# Letrozole

CASRN: 112809-51-5

## Drug Levels and Effects

### Summary of Use during Lactation

A minimal amount of information on letrozole excretion into milk indicates that the amounts might be of concern. Because of harm reported in animal studies, the manufacturer recommends that breastfeeding be discontinued during letrozole therapy and for 3 weeks after the last dose.

### Drug Levels

Maternal Levels. An abstract reported that a relative infant dose of 10.2% was found in nursing mother(s) taking letrozole, who provided 8 milk samples over 24 hours, but other details were not supplied.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Monfort A, Jutras M, Martin B, et al. New data on the transfer of untested medication into breast milk. Birth Defects Res 2021;113:831.

## Substance Identification

### Substance Name

Letrozole

### CAS Registry Number

112809-51-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Aromatase Inhibitors